# Sodium Ferric Gluconate Complex

CASRN: 34089-81-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of sodium ferric gluconate complex during breastfeeding. Ferrlecit contains 9 mg/mL of benzyl alcohol, which may enter breastmilk and be absorbed by the infant. An alternate intravenous drug with more published data available may be preferred. For additional information on iron use during breastfeeding, see the monograph on Iron Salts.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ferric Carboxymaltose, Ferric Derisomaltose, Iron Sucrose

## Substance Identification

### Substance Name

Sodium Ferric Gluconate Complex

### CAS Registry Number

34089-81-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Ferric Compounds

Hematinics

Iron Compounds